# Glatiramer

CASRN: 28704-27-0

## Drug Levels and Effects

### Summary of Use during Lactation

Glatiramer is the active portion of the drug, glatiramer acetate. Breastfeeding is not expected to result in clinically relevant exposure of the infant to the drug. Follow-up of infants indicates that maternal use of glatiramer acetate does not appear to cause any adverse effects in breastfed infants. Glatiramer acetate is generally considered safe by most experts and is one of the preferred disease-modifying agents for treating multiple sclerosis during breastfeeding.[1-6] No special precautions appear to be required during breastfeeding while using glatiramer and breastfeeding can resume immediately after injection.[7]

### Drug Levels

Maternal Levels. In a manufacturer-sponsored study, healthy volunteers were given 60 mg of glatiramer acetate subcutaneously. Blood samples were obtained at 5, 15, 30, 60, 120, 240, and 360 minutes after injection. Glatiramer was undetectable (<50 mcg/L) in the serum of 8 of 17 subjects; it was detectable for up to 30 minutes in 8 subjects and up to 360 minutes in one other. Assuming that milk levels equal peak serum levels, the authors estimated that in the worst-case scenario, an exclusively breastfed infant would receive a relative infant dose of 9% of the maternal weight-adjusted dosage in milk. However, the infant would be systemically exposed to a maximum of only 0.2% of the mother’s dose when the poor oral bioavailability is considered.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Nine mothers received glatiramer acetate (dosage not stated) during pregnancy and postpartum for multiple sclerosis and breastfed their infants for an average of 3.6 months (range 1 to 12 months). No infections, signs of inadequate digestion or other important ill effects were reported in their breastfed infants during the neonatal period. Follow-up of the infants at 1 year or longer found no neurological or developmental deficits in the infants except for one otherwise normal infant with delayed language development who had been breastfed for 3 months.[9]

Three mothers received glatiramer acetate (dosage not stated) for multiple sclerosis during pregnancy and postpartum. All of their infants were exclusively breastfed for 6 months and no noticeable problems were reported in any of them.[10]

In data collected from 4 countries, 41 women received glatiramer acetate, and 17 women received interferon during pregnancy and postpartum for treatment of multiple sclerosis. Of these, 63% breastfed (extent not stated) their infants for a mean of 8.8 months. No mention was made of adverse reactions in breastfed infants.[11]

Among 1182 live birth pregnancies in the manufacturer’s pharmacovigilance database, breastfeeding was reported for 14.3% of women (n = 169). During the first month after birth breastfeeding was reported in 10 mothers using 20 mg/mL daily and 64 using the 40 mg/mL three times weekly dosage regimen. Follow-up questionnaires were sent to patients or their healthcare providers at 1 and 12 months postpartum. Among 40 women who completed the 12-month questionnaires, 3 received the 20 mg/mL dose, 36 received the 40 mg/mL dose, and 1 received both doses. Of 27 women with known breastfeeding practices, exclusive breastfeeding for 4 or more months was reported for 17 (63.0%) respondents. Partial breastfeeding, defined as breastfeeding for less than 4 months or mixed breast and bottle feeding, was reported for ten (37.0%) mothers. The mean duration of exposure while breastfeeding was 7 months (SD = 4.3 months) with durations up to 13 months. Of 40 breastfeeding women, infant characteristics at birth and at approximately 12 months of age were available for 18 breastfed infants, all with the 40 mg/mL dose. The mean infant weight and length at birth and 12 months were within the normal range for the World Health Organization z-score and percentiles.[12] A follow-up study was conducted at 4 years. Of the 384 women who completed a questionnaire at 12 months postpartum, 146 reported infant glatiramer exposure during breastfeeding. Sixty-two women reported exclusive breastfeeding for 4 or more months, 21 reported partial breastfeeding, and 43 had ongoing breastfeeding of unknown duration. The average duration of glatiramer exposure during breastfeeding was 8 months (SD = 5.2) with maximum duration up to 30 months. Some infants had respiratory infections, with 12 of 125 requiring hospitalization. Length and weight information for 55 infants at 12 months were within the normal range of WHO z-score and percentiles.[13] A further follow-up with data from June 1, 2018, to March 31, 2025 identified 281 infants who were breastfed by mothers taking glatiramer. Among 175 breastfed infants with available hospitalization data, 15 (8.6%) experienced hospitalization for various reasons. Overall, 66 infants with known growth measurements showed normal weight-to-length ratios and age-appropriate growth.[14]

In a retrospective, non-interventional, study from the German Multiple Sclerosis & Pregnancy Registry, 60 infants breastfed by mothers with multiple sclerosis treated with glatiramer were compared to 60 breastfed infants of mothers with MS not treated with a disease-modifying therapy. The median duration of breastfeeding during glatiramer use was 7 months (range 0.2 to 19.1 months). No difference was found in the number of hospitalizations for infection between the two groups up to 18 months of age. No differences in weight, length, or head circumference were seen between infants in the two cohorts up to 12 months of age.[15] A follow-up analysis found no difference in the number or types of serious adverse effects in infants between the two groups.[3]

A mother taking glatiramer reported that her newborn infant who was 50% breastfed experienced hypoglycemia. The reaction was rated as possible, but mild.[16]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Immune Globulin, Interferon Beta, Methylprednisolone

### References

1 Thöne J, Thiel S, Gold R, . Treatment of multiple sclerosis during pregnancy - safety considerations. Expert Opin Drug Saf 2017;16:523-34.28333552
2 Dobson R, Hellwig K. Use of disease-modifying drugs during pregnancy and breastfeeding. Curr Opin Neurol 2021;34:303-11.33709977
3 Ciplea AI, Kurzeja A, Thiel S, . Safety evaluations of offspring breastfed by mothers receiving glatiramer acetate for relapsing multiple sclerosis. Mult Scler Relat Disord 2023;75:104771.37245349
4 Freedman MS, Devonshire V, Duquette P, . Treatment optimization in multiple sclerosis: Canadian MS Working Group recommendations. Can J Neurol Sci 2020;47:437-55.32654681
5 Shipley J, Beharry J, Yeh W, . Consensus recommendations on multiple sclerosis management in Australia and New Zealand: Part 2. Med J Aust 2025;222:365-71.39923190
6 Mullan G, Ford HL, Blackall P, . UK consensus on pregnancy in multiple sclerosis: An update to ‘Association of British Neurologists’ guidance. Mult Scler 2026;32:885-96.42397849
7 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
8 Ashkenazi N, Hallak H. Evaluation of the potential newborn exposure to glatiramer acetate (Copaxone) via lactation. Eur J Neurol 2022;29:467. doi:10.1111/ene.15466
9 Fragoso YD, Finkelsztejn A, Kaimen-Maciel DR, . Long-term use of glatiramer acetate by 11 pregnant women with multiple sclerosis: A retrospective, multicentre case series. CNS Drugs 2010;24:969-76.20806993
10 Hellwig K, Gold R. Glatiramer acetate and interferon-beta throughout gestation and postpartum in women with multiple sclerosis. J Neurol 2011;258:502-3.20878174
11 Fragoso YD, Boggild M, Macias-Islas MA, . The effects of long-term exposure to disease-modifying drugs during pregnancy in multiple sclerosis. Clin Neurol Neurosurg 2013;115:154-9.22633835
12 Kaplan S, Zeygarnik M, Stern T. Pregnancy, fetal, and infant outcomes following maternal exposure to glatiramer acetate during pregnancy and breastfeeding. Drug Saf 2022;45:345-57.35297004
13 Kaplan S, Ghimpeteanu A, Dragut CF. Pregnancy and infant outcomes in women with multiple sclerosis exposed to glatiramer acetate therapy: An extended 4-year safety update. Drug Saf 2025;48:697-713.40106171
14 Kaplan S, Carollo M, Dragut CF. Cumulative six-year safety outcomes of glatiramer acetate exposure during pregnancy and breastfeeding. J Neurol 2026;273:336.42176094
15 Ciplea AI, Kurzeja A, Thiel S, . Eighteen-month safety analysis of offspring breastfed by mothers receiving glatiramer acetate therapy for relapsing multiple sclerosis - COBRA study. Mult Scler 2022;28:1641-50.35362346
16 Morze K, Szałek E, Waszyk-Nowaczyk M. Minding the gap. Drug-related problems among breastfeeding women. Front Pharmacol 2025;16:1542269.40183105

## Substance Identification

### Substance Name

Glatiramer

### CAS Registry Number

28704-27-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunologic Adjuvants